# Sarecycline

CASRN: 1035654-66-0

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of sarecycline during breastfeeding. For acne treatment, it is taken for 12 weeks or longer. Such prolonged courses of tetracyclines are not recommended because if even a small fraction is absorbed by the infant from milk, it could have a cumulative staining effect on the infant’s permanent teeth.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Sarecycline

### CAS Registry Number

1035654-66-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antibacterial Agents

Tetracyclines